# Tramadol

CASRN: 27203-92-5

## Drug Levels and Effects

### Summary of Use during Lactation

The excretion of tramadol into milk is low and even lower amounts of the active metabolite, O-desmethyltramadol, are excreted. With usual maternal dosage, the amount excreted into breastmilk is much less than the dose that has been given to newborn infants for analgesia and is unlikely to adversely affect nursing infants.[1] Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. The US Food and Drug Administration and the manufacturer recommend against the use of tramadol during breastfeeding.[2] If the mother of a newborn requires tramadol, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of oral tramadol to 2 to 3 days at a low dosage with close infant monitoring. If tramadol is used, monitor infants for increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties or limpness, and contact a physician immediately if any of these occur. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

### Drug Levels

In adults, tramadol has 70 to 100% oral bioavailability and is metabolized to the active O-desmethyltramadol (M1). Tramadol has a more potent monoamine reuptake inhibitory effect while M1 has a more potent opioid mu-agonist effect. M1 is about 10% as potent as morphine in mu-opiate binding, although some investigators have reported a 450-fold potency difference. Women who are extensive metabolizers of tramadol may have higher than expected serum levels of M1, potentially leading to higher levels of M1 in breastmilk. The capacity of preterm and newborn infants to metabolize tramadol to M1 is limited.[3]

Maternal Levels. The manufacturer reports that in the 16 hours following a 100 mg intravenous dose of tramadol, the cumulative excretion into breastmilk was 100 mcg of tramadol and 27 mcg of M1. No further details are provided.

Detectable levels (>12 mcg/L) of tramadol were found in samples of breastmilk collected 10 hours after a 50 mg maternal dose of intravenous or oral tramadol.[4] No other clinical details or milk levels were reported.

One mother was taking oral tramadol 300 mg daily during pregnancy and presumably the same dose postpartum for chronic back pain. On approximately day 3 postpartum (time not specified), the breastmilk concentration of tramadol was 1.8 mg/L.[5]

Seventy-five mothers who were 2 to 4 days postpartum provided 3 milk samples from both breasts during the 6 hours following a dose of 100 mg of oral tramadol after taking at least 4 doses. The average milk concentration of tramadol was 748 mcg/L and of M1 was 203 mcg/L. These values translate to an average infant dosage of 112 and 30 mcg/kg daily of the drug and metabolite, respectively. An exclusively breastfed infant would receive maternal weight-adjusted dosages of 2.24% of tramadol and 0.64% of its metabolite.[6]

Reanalysis of the above data using a pharmacokinetic model with first-pass conversion rates based on literature values and simulating a maternal dosage of 100 mg every 6 hours yielded average milk tramadol levels of 0.82 mg/L in extensive metabolizers and 0.99 mg/L in poor metabolizers. Average M1 milk levels were 0.36 mg/L and 0.18 mg/L, respectively. Infant exposure to tramadol and M1 was the same in both phenotype groups and represented 3.1% of the maternal weight-adjusted tramadol dose.[7] Based on this analysis, the average daily dosage of tramadol excreted in milk in poor metabolizers would be 0.15 mg/kg, which is 2.6% of the maternal weight-adjusted tramadol dose, and 1.5% of the recommended daily intravenous neonatal tramadol dose of 10 mg/kg.[3] The average daily dosage of M1 excreted in milk in extensive metabolizers would be 0.054 mg/kg, which represents 2% to 3% of the normal daily neonatal intravenous morphine equivalent dosage.

A woman on methadone maintenance was breastfeeding her neonate. She was reportedly taking tramadol 50 mg orally at an unknown frequency. Foremilk samples were taken on days 12 and 20 postpartum at unknown times relative to the previous dose. Breastmilk on day 12 postpartum contained tramadol 63 mcg/L, O-desmethyltramadol 22 mcg/L, and N-desmethyltramadol 76 mcg/L. Breastmilk on day 20 postpartum contained tramadol 1254 mcg/L, O-desmethyltramadol 388/L, and N-desmethyltramadol 937 mcg/L.[8]

Infant Levels. An infant was born to a mother who as taking 300 mg of tramadol daily for chronic back pain. By day 3, the infant was exclusively breastfeeding, and a serum concentration was obtained (time not specified). The infant's tramadol serum concentration was 2 mcg/L. A typical serum tramadol level in neonates given tramadol intravenously for pain is 200 mcg/L.[5]

A woman on methadone maintenance was breastfeeding her neonate. She was reportedly taking tramadol 50 mg orally at an unknown frequency. Oral fluid samples collected from her infant on day 12 at 15:40 had no detectable drug or metabolites. On day 21 at 20:00, the oral fluid contained tramadol 1011 mcg/L, O-desmethyltramadol 1499 mcg/L, and N-desmethyltramadol 406 mcg/L. The infant’s urine on day 12 contained no detectable tramadol, O-desmethyltramadol or N-desmethyltramadol. The infant’s urine on day 20 contained 14 mcg/L of tramadol and <10 mcg/L of O-desmethyltramadol of N-desmethyltramadol.[8]

### Effects in Breastfed Infants

Seventy-five breastfed infants whose mothers were breastfeeding and taking tramadol 100 mg, every 6 hours following a cesarean section were compared to 75 matched infants at 2 to 4 days of age. Forty-nine percent of the mothers who were taking tramadol and all of the control mothers were taking other opiates (primarily oxycodone) and 61% of and 58%, respectively, also were taking a nonsteroidal anti-inflammatory agent (primarily diclofenac). Examination by a pediatrician revealed no difference between the groups using the Neurologic and Adaptive Capacity Score.[6]

An 8-month-old infant was brought to an emergency department (ED) in Egypt with altered mental status, hypoxia, hypotension and a low hematocrit. In the ICU, the infant had a positive urine drug screen for tramadol and a negative urine test for cannabinoids and opiates. Two doses of naloxone improved her blood gases and 2 days later her mental status had improved. The infant’s parents stated that they were addicted to tramadol, and the mother was breastfeeding the infant. The infant was discharged on day 3 after admission. Thirty-six hours later, the infant again presented to the ED with cardiopulmonary arrest, with a 4 on the Glasgow coma scale and generalized clonic-tonic seizures. The infant died from cardiac arrest 3 days after admission. The mother stated that she had breastfed the infant after the initial discharge from the hospital. The author speculates that mother or infant might be an ultra-rapid CYP2D6 metabolizer leading to high levels of the active metabolite, because this variant is relatively prevalent in those of Mediterranean origin. However, neither genetic testing nor measurement of tramadol in milk or the infant were performed.[9] This case cannot definitely be attributed to breastmilk exposure alone, because the sudden onset of the symptoms at 8-months of age seems implausible. It is somewhat more likely that the baby ingested the tramadol directly.

A trial in women who received a cesarean section randomized participants to receive 2 tablets of acetaminophen 325 mg and tramadol 35.5 mg (Zaldiar, Gruenthal, Israel) every 6 hours as well as diclofenac 100 mg at 12, 24 and 48 hours after arrival in the maternity ward, either as a fixed dose or the same drugs on demand. No differences were noted in neonatal outcomes of peak bilirubin, need for phototherapy, and adverse effects, including irritability or altered consciousness. No adverse infant effects were seen.[10]

A hospital in Japan provided postpartum mothers with a combination tablet containing tramadol 37.5 mg and acetaminophen 325 mg every 6 hours for 3 days if they requested a pain medication. A retrospective analysis found that of 148 mothers who received the drug, all infants were breastfed and none of the infants had an adverse reaction, such as drowsiness, difficulty breastfeeding or breathing problems.[11] The relatively low dose and short duration of therapy may have reduced the risk of adverse reactions.

A cross-sectional survey of mothers who had breastfed their infants in the past 12 months identified 142 mothers who had taken one or more medications while nursing. One of the mothers who was taking tramadol reported that her infant developed drowsiness, which caused her to change the time of feeding.[12]

### Effects on Lactation and Breastmilk

Tramadol can increase serum prolactin.[13] Hyperprolactinemia and galactorrhea was reported in a woman who was abusing high doses of tramadol injection.[14] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A randomized study compared tramadol and naproxen for post-cesarean section pain. Patients received the drugs either on a fixed schedule or as needed. No difference in breastfeeding rates were seen among the groups.[15] Similarly, a study compared a 100 mg tramadol rectal suppository to a 100 mg diclofenac rectal suppository for postpartum pain after closure of the surgical wound of a cesarean section. No difference in breastfeeding initiation rates within 2 hours were observed between the groups.[16]

In a study in China, women with a scheduled cesarean section were randomized to receive intravenous patient-controlled analgesia with either sufentanil or tramadol. Postpartum prolactin levels were higher in the tramadol group (348 mcg/L) than in the sufentanil group (314 mcg/L). The onset of lactation was sooner in the tramadol group (21.4 hours) than in the sufentanil group (25.1 hours). Both of these difference were statistically significant.[17] Injectable tramadol is not available in the United States.

A trial in women who received a cesarean section randomized participants to receive 2 tablets of acetaminophen 325 mg and tramadol 35.5 mg (Zaldiar, Gruenthal, Israel) every 6 hours as well as diclofenac 100 mg at 12, 24 and 48 hours after arrival in the maternity ward, either as a fixed dose or the same drugs on demand. Patients on the fixed dose regimen had more breastfeeds (23.8 vs 19.2) and fewer instances of formula (8.2 vs 11.9) than the on demand group.[10]

A nonrandomized, nonblinded study in a Serbian hospital of women near term who underwent cesarean section compared general anesthesia (n = 284) to spinal or epidural anesthesia (n = 249). Spinal anesthesia consisted of hyperbaric bupivacaine 12 mg and fentanyl 0.01 mg; epidural anesthesia consisted of isobaric bupivacaine 0.5% (0.5 mg per 10 cm height) and fentanyl 0.05 mg. General anesthesia consisted of propofol 2.3 mg/kg and succinylcholine 1.5 mg/kg for induction and intubation, followed by an anesthetic gas mixture and oxygen. Reportedly, nitric oxide (possibly nitrous oxide) was 50% of the gas before delivery and 67% after delivery. Sevoflurane was also used in some cases. After delivery and cord clamping, mothers received fentanyl 3 mcg/kg and rocuronium 0.5 mg/kg intravenously for placental delivery. After surgery, neuromuscular block reversal was performed with neostigmine and atropine. All patients received 1 mg/kg of diclofenac every 8 h for 24 hours after delivery and 98% of general anesthesia patients also received 100 mg of tramadol and 78.5% received acetaminophen 1 gram. No regional anesthesia patients received tramadol or acetaminophen. Patients receiving one of the regional anesthetic protocols established lactation sooner (56% and 29% after 18 and 24 hours, respectively), while 86% of women receiving general anesthesia did not establish lactation until 36 to 48 hours after surgery.[18]

A randomized, double-blind study was performed in pregnant women scheduled for cesarean section under spinal anesthesia with bupivacaine and fentanyl. Patients received either 100 mg diclofenac (n = 100), 100 mg tramadol (n = 100) or placebo (glycerin suppositories) n = 100, all given as rectal suppositories every 8 hours for the first 24 hours after surgery. The time to initiate breastfeeding was significantly shorter among mothers who received tramadol than a placebo, 1.7 vs 4.1 hours with breastfeeding support and 3.7 vs 6.2 hours without support. Diclofenac was slightly more effective than tramadol among mothers who received no support (3.5 vs 3.7 hours).[19]

An observational study evaluated tramadol for postoperative pain management in 100 patients with preeclampsia undergoing lower-segment cesarean section at a tertiary care teaching hospital. The tramadol dosage regimen was not stated. Tramadol treatment was associated with successful initiation of exclusive breastfeeding by day 2 in all patients.[20]

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Palmer GM, Anderson BJ, Linscott DK, et al. Tramadol, breast feeding and safety in the newborn. Arch Dis Child 2018;103:1110–3.29599166
2 United States Food and Drug Administration. FDA Drug Safety Communication: FDA restricts use of prescription codeine pain and cough medicines and tramadol pain medicines in children; recommends against use in breastfeeding women. 2017;April 20https://www.fda.gov/Drugs/DrugSafety/ucm549679.htm
3 Allegaert K, Rochette A, Veyckemans F. Developmental pharmacology of tramadol during infancy: ontogeny, pharmacogenetics and elimination clearance. Paediatr Anaesth 2011;21:266–73.20723094
4 Kmetec V, Roskar R. HPLC determination of tramadol in human breast milk. J Pharm Biomed Anal 2003;32:1061–6.12899994
5 Hartenstein S, Proquitte H, Bauer S, et al. Neonatal abstinence syndrome (NAS) after intrauterine exposure to tramadol. J Perinat Med 2010;38:695–6.20707626
6 Ilett KF, Paech MJ, Page-Sharp M, et al. Use of a sparse sampling study design to assess transfer of tramadol and its O-desmethyl metabolite into transitional breast milk. Br J Clin Pharmacol 2008;65:661–6.18294329
7 Salman S, Sy SK, Ilett KF, et al. Population pharmacokinetic modeling of tramadol and its O-desmethyl metabolite in plasma and breast milk. Eur J Clin Pharmacol 2011;67:899–908.21394525
8 Gesseck AM, Nanco CR, Hendricks-Muñoz KD, et al. Neonatal exposure to tramadol through mother's breast milk. J Anal Toxicol 2021;45:840–6.34037761
9 Hussien R. Tramadol intoxication in an 8-months-old infant through breastfeeding: A case report. J Clin Toxicol 2017;7:335. doi:10.4172/2161-0495.1000335
10 Yefet E, Taha H, Salim R, et al. Fixed time interval compared with on-demand oral analgesia protocols for post-caesarean pain: A randomised controlled trial. BJOG 2017;124:1063–70.28236348
11 Nagae Seika P, Taizan K, Mariko S, et al. Safety of tramadol hydrochloride/acetaminophen combination tablet use for postpartum pain. J Obstet Gynaecol Res 2021;47:2919. doi:10.1111/jog.14876
12 Ahmadzai H, Tee LBG, Crowe A. Adverse drug reactions in breastfed infants: A cross-sectional study of lactating mothers. Breastfeed Med 2022;17:1011–17.36315169
13 Seitz W, Kirchner E, Schaps D, et al. Endocrine reaction pattern in the course of a one-phase tramadol-N2O combination anesthesia. Anasth Intensivther Notfallmed 1982;17:325–31.6297329
14 Meenakshi R, Balamurali K, Anbazhagan G. A unique case of galactorrhea caused by tramadol dependency in a 32-year-old female- a case report. Indian J Psychiatry 2024;66 (Suppl 1):S192. doi:10.4103/0019-5545.394305
15 Sammour RN, Ohel G, Cohen M, et al. Oral naproxen versus oral tramadol for analgesia after cesarean delivery. Int J Gynaecol Obstet 2011;113:144–7.21435642
16 Singhal S, Rani A. Comparative study of preventive analgesia using diclofenac suppository, tramadol suppository and paracetamol infusion in post-caesarean pain relief. Int J Life Sci Biotechnol Pharma Res 2025;14:312–20. doi:10.69605/ijlbpr_14.5.2025.58
17 Chi X, Li M, Mei W, et al. Comparison of patient-controlled intravenous analgesia with sufentanil versus tramadol in post-cesarean section pain management and lactation after general anesthesia - a prospective, randomized, double-blind, controlled study. J Pain Res 2017;10:1521–7.28740418
18 Stanisic DM, Kalezic N, Rakic A, et al. Comparison of post-cesarean pain perception of general versus regional anesthesia, a single-center study. Medicina (Kaunas) 2022;59:44.36676668
19 Hooda R, Malik N, Pathak P, et al. Impact of postoperative pain on early initiation of breastfeeding and ambulation after cesarean section: A randomized trial. Breastfeed Med 2023;18:132–7.36800334
20 Borade SB, Sarang G, Jahagirdar S, et al. Evaluate the efficacy and safety of tramadol in post-LSCS pain management in patients with preeclampsia. SSR Institute of International Journal of Life Sciences 2025;11:8013–8. doi:10.21276/SSR-IIJLS.2025.11.4.32

## Substance Identification

### Substance Name

Tramadol

### CAS Registry Number

27203-92-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics